# Dihydroergotamine

CASRN: 511-12-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of dihydroergotamine during breastfeeding. Because it might cause adverse effects in the infant and decrease the milk supply, most authorities consider ergotamine to be contraindicated during nursing.[1-3] The manufacturer of the dihydroergotamine nasal spray recommends that nursing mother should not breastfeed during treatment and for 3 days after the last dose. Any milk that is pumped during this time should be discarded.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Eletriptan, Rizatriptan, Sumatriptan, Zolmitriptan

### References

1 Davanzo R, Bua J, Paloni G, et al. (2014). Breastfeeding and migraine drugs. Eur J Clin Pharmacol.
2 MacGregor EA. (2014). Migraine in pregnancy and lactation. Neurol Sci.
3 Anderson PO. (2019). Migraine drug therapy during breastfeeding. Breastfeed Med.

## Substance Identification

### Substance Name

Dihydroergotamine

### CAS Registry Number

511-12-6

### Drug Class

Breast Feeding

Lactation

Analgesics, Non-Narcotic

Dopamine Agonists

Vasoconstrictor Agents